# Busulfan

CASRN: 55-98-1

## Drug Levels and Effects

### Summary of Use during Lactation

Most sources consider breastfeeding to be contraindicated during maternal antineoplastic drug therapy.[1] It might be possible to breastfeed safely with busulfan during intermittent therapy with an appropriate period of breastfeeding abstinence. Although minimal data are available to determine an appropriate period to withhold breastfeeding, the drug's terminal half-live of 2.5 hours suggests that at least 24 hours may be sufficient. Chemotherapy may adversely affect the normal microbiome and chemical makeup of breastmilk.[2] Women who receive chemotherapy during pregnancy are more likely to have difficulty nursing their infant.[3]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Busulfan in a dosage of 4 mg daily for 5 weeks was taken for myeloid leukemia by one woman while breastfeeding. Weekly monitoring found no adverse effects on her infant's leukocyte count or hemoglobin.[4]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Pistilli B, Bellettini G, Giovannetti E, et al. (2013). Chemotherapy, targeted agents, antiemetics and growth-factors in human milk: How should we counsel cancer patients about breastfeeding?. Cancer Treat Rev.
2 Urbaniak C, McMillan A, Angelini M, et al. (2014). Effect of chemotherapy on the microbiota and metabolome of human milk, a case report. Microbiome.
3 Stopenski S, Aslam A, Zhang X, et al. (2017). After chemotherapy treatment for maternal cancer during pregnancy, is breastfeeding possible?. Breastfeed Med.
4 Bounameaux Y, Durenne JM. (1964). Ann Soc Belge Med Trop.

## Substance Identification

### Substance Name

Busulfan

### CAS Registry Number

55-98-1

### Drug Class

Breast Feeding

Lactation

Antineoplastic Agents

Alkylating Agents